# Ethiodized Oil

CASRN: 8008-53-5

## Drug Levels and Effects

### Summary of Use during Lactation

Ethiodized oil use causes large increases milk iodine concentrations, which may interfere with the thyroid function of the breastfed infant. interfere with the thyroid function of the breastfed infant. Breastfeeding should be suspended until concentrations normalize. The time for milk iodine levels to normalize is unknown, but may be 2 weeks or longer, depending on the dose. Consider thyroid function testing in a breastfed infant whose mother was exposed to ethiodized oil.

### Drug Levels

Maternal Levels. A nursing mother with metastatic thyroid cancer developed a chyle leak on postoperative day 1 after a modified radical neck dissection. After unsuccessful conservative management of the chyle leak, the interventional radiology service performed a lymphangiography and sclerotherapy under general anesthesia on postoperative day 2. The patient received 30 mL of iohexol for imaging, and 20 mL of ethiodized oil for imaging and sclerotherapy. The iodine concentrations in frozen pumped milk collected on post-procedure days 8 to 11 yielded iodine ranging from 9.6 to 21.2 ppm, 50 to 100 times the typical human milk concentration, without a consistent decline over time.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Barnett KM, Baqai-Stern A, Rose G, et al. Periprocedural lactation considerations after use of ethiodized oil in an interventional radiology patient: A case report. A and A Practice 2025;19:e02124

## Substance Identification

### Substance Name

Ethiodized Oil

### CAS Registry Number

8008-53-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Contrast Media